# Naldemedine

CASRN: 916072-89-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of naldemedine during breastfeeding. The manufacturer recommends avoiding breastfeeding in mothers taking naldemedine and for 3 days after the last dose. Because naldemedine is 93% to 94% bound to plasma proteins, the amount in milk is likely to be low. Observe breastfed infants who have been exposed to opioids during pregnancy or postpartum for signs of opioid withdrawal, especially diarrhea.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Methylnaltrexone

## Substance Identification

### Substance Name

Naldemedine

### CAS Registry Number

916072-89-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Narcotic Antagonists